# Eluxadoline

CASRN: 864821-90-9

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of eluxadoline during breastfeeding. Because it has opioid agonist activity, an alternate drug is preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Irritable Bowel syndrome) Alosetron, Cholestyramine, Colesevelam, Colestipol, Loperamide, Ondansetron, Rifaximin

## Substance Identification

### Substance Name

Eluxadoline

### CAS Registry Number

864821-90-9

### Drug Class

- Breastfeeding
- Lactation
- Gastrointestinal Agents